# Permethrin

CASRN: 52645-53-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because less than 2% is absorbed after topical application, rapid metabolism to inactive metabolites and safe application directly on infants’ skin, topical permethrin products are acceptable in nursing mothers.[1–5] Extensive exposure, such as from agricultural use or malaria control might have long-term health concerns because residues can be found in breastmilk.[6] Only water-miscible cream, gel or liquid products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[7]

### Drug Levels

Maternal Levels. Permethrin was measured in 53 breastmilk samples from 29 mothers collected 1998 to 1999 in Basel Switzerland. Permethrin was detected in 25 milk samples, even in mothers from households that reported no permethrin use. The average permethrin concentration was 74 mcg/kg of fat (range undetectable [<60 mcg/kg] to 152 mcg/kg fat).[8]

Permethrin was found in the breastmilk of nursing mothers in 3 South African towns. Average levels in breastmilk ranged from 8.3 to 48.4 mcg/L in the 3 towns. The source was thought to be from a dusting powder widely available and used in gardening. The dosage and route of exposure (i.e., topical, inhalation, oral) could not be determined. All milk levels were below the allowable daily limit for permethrin.[9,10]

Samples of mature milk were collected in 2002 from 22 mothers in Mozambique where pyrethrins were used for mosquito control in the thatching of homes from 1993 to 2000 and continued to be used in bed netting after this period. The average permethrin concentration in the milk samples was 79 mcg/kg of lipid; the median concentration was 55 mcg/kg of lipid (range 10 to 230 mcg/kg of lipid). The milk permethrin levels in all mothers were below the allowable daily limit for permethrin.[11]

Breastmilk samples from mothers in Brazil, Colombia and Spain were analyzed for pyrethroids. Permethrin was detected in all samples, regardless of reported household usage. Samples from rural Brazil (n = 9) contained a mean permethrin concentration of 3.57 ng/gram of lipid. Samples from Sao Paulo (n = 8) contained a mean permethrin concentration of 0.36 ng/gram of lipid. Samples from Santiago de Cali, Colombia (n = 27) contained a mean permethrin concentration of 0.91 ng/gram of lipid. Samples from Barcelona, Spain (n = 6) contained a mean permethrin concentration of 2.2 ng/gram of lipid. Other pyrethroids were also detected, but estimated daily intakes by breastfed infants were all below acceptable daily intake limits.[12]

Breastmilk samples from 79 women from a lactation study at the University of California Davis had their breastmilk tested for the presence of trans-permethrin on day 42 postpartum. The mean concentration found was 7.8 mcg/L (range 0.43 to 150.3 mcg/L).[13]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a telephone follow-up study, 5 mothers who used permethrin during breastfeeding reported no adverse reactions in their breastfed infants.[14]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ivermectin, Pyrethrins

### References

1 Porto I. Antiparasitic drugs and lactation: Focus on anthelmintics, scabicides, and pediculicides. J Hum Lact 2003;19:421–5.14620457
2 Leachman SA, Reed BR. The use of dermatologic drugs in pregnancy and lactation. Dermatol Clin 2006;24:167–97.16677965
3 Salavastru CM, Chosidow O, Boffa MJ, . European guideline for the management of scabies. J Eur Acad Dermatol Venereol 2017;31:1248–53.28639722
4 Morand A, Weill A, Miquel J, . Management of scabies in children under 15 kg and pregnant or breastfeeding women: recommendations supported by the Centre of Evidence of the French Society of Dermatology. Br J Dermatol 2024;191:1014–16.39028660
5 Morris G, Haddow L, Sashidharan PN, . British Association for Sexual Health and HIV National Guideline on the Management of Scabies in adults 2025. Int J STD AIDS 2025;36:516–32.40103364
6 Bouwman H, Kylin H. Malaria control insecticide residues in breast milk: the need to consider infant health risks. Environ Health Perspect 2009;117:1477–80.20019894
7 Noti A, Grob K, Biedermann M, . Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol 2003;38:317–25.14623482
8 Zehringer M, Herrmann A. Analysis of polychlorinated biphenyls, pyrethroid insecticides and fragrances in human milk using a laminar cup liner in the GC injector. Eur Food Res Technol 2001;212:247–51. doi:10.1007/s002170000223
9 Sereda B, Bouwman H, Kylin H. Comparing water, bovine milk, and indoor residual spraying as possible sources of DDT and pyrethroid residues in breast milk. J Toxicol Environ Health A 2009;72:842–51.19557612
10 Bouwman H, Sereda B, Meinhardt HM. Simultaneous presence of DDT and pyrethroid residues in human breast milk from a malaria endemic area in South Africa. Environ Pollut 2006;144:902–17.16564119
11 Feo ML, Eljarrat E, Manaca MN, . Pyrethroid use-malaria control and individual applications by households for other pests and home garden use. Environ Int 2012;38:67–72.21982035
12 Corcellas C, Feo ML, Torres JP, . Pyrethroids in human breast milk: Occurrence and nursing daily intake estimation. Environ Int 2012;47:17–22.22717642
13 Pedersen TL, Smilowitz JT, Winter CK, . Quantification of nonpersistent pesticides in small volumes of human breast milk with ultrahigh performance liquid chromatography coupled to tandem mass spectrometry. J Agric Food Chem 2021;69:6676–89.34098718
14 Ito S, Blajchman A, Stephenson M, . Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393–9.8498418

## Substance Identification

### Substance Name

Permethrin

### CAS Registry Number

52645-53-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Insecticides